# Fenoldopam

CASRN: 67227-56-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of fenoldopam during breastfeeding. The manufacturer recommends avoiding breastfeeding during fenoldopam use; however, because of its poor oral bioavailability and short half-life, any fenoldopam in milk is unlikely to adversely affect the breastfed infant. Also, fenoldopam can be given intravenously to infants. Unlike dopamine, it does not decrease serum prolactin concentrations and might not interfere with nursing.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Unlike dopamine, fenoldopam infusion does not affect serum prolactin concentration in normal women.[1] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Hypertension) Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydralazine, Labetalol, Methyldopa, Propranolol

### References

1 Boesgaard S, Hagen C, Hangaard J, et al. Pulsatile gonadotropin secretion and basal prolactin levels during dopamine D-1 receptor stimulation in normal women. Fertil Steril 1991;55:281-6.1671361

## Substance Identification

### Substance Name

Fenoldopam

### CAS Registry Number

67227-56-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Dopamine Agents

Dopamine Agonists

Vasodilator Agents